# Desipramine

CASRN: 50-47-5

## Drug Levels and Effects

### Summary of Use during Lactation

Milk levels of desipramine and its metabolite are low and have not been detected in the serum of breastfed infants. Immediate side effects have not been reported and a limited amount of follow-up has found no adverse effects on infant growth and development. Desipramine use during breastfeeding would usually not be expected to cause any adverse effects in breastfed infants, especially if the infant is older than 2 months. A safety scoring system finds desipramine use to be possible during breastfeeding.[1]

### Drug Levels

Desipramine is metabolized to 2-hydroxydesipramine which has antidepressant activity equal to that of desipramine.[2]

Maternal Levels. A mother who was taking desipramine 300 mg daily had average milk desipramine plus 2-hydroxydesipramine milk levels of 338 mcg/L at 9 hours after the dose 10 to 11 weeks postpartum.[3]

Infant Levels. Two infants whose mothers were taking desipramine during pregnancy and lactation with a maternal dosage of 200 mg daily. One infant was tested at 2.3 and 14.9 weeks of age while breastfeeding 7 to 9 times daily and the other was tested at 5.4 weeks of age while breastfeeding 10 to 12 weeks of age. Neither had detectable (<25 mcg/L) serum desipramine.[4]

Two other infants had mothers who began desipramine postpartum. One infant whose mother took desipramine 150 mg daily was tested at 12.3 weeks of age while breastfeeding 4 to 6 times daily. The other whose mother took desipramine 37 mg daily was tested at 33 weeks of age while breastfeeding 0 to 3 times daily. Both had undetectable (<10 mcg/L) serum desipramine levels.[4]

### Effects in Breastfed Infants

One infant whose mother took desipramine 100 mg daily for 8 weeks starting at 16 weeks postpartum was followed up at 36 months of age. No adverse effects on growth and development were found.[5]

### Effects on Lactation and Breastmilk

Desipramine has caused increased serum prolactin levels in some patients.[6] The clinical relevance of these findings in nursing mothers is not known. The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

An observational study looked at outcomes of 2859 women who took an antidepressant during the 2 years prior to pregnancy. Compared to women who did not take an antidepressant during pregnancy, mothers who took an antidepressant during all 3 trimesters of pregnancy were 37% less likely to be breastfeeding upon hospital discharge. Mothers who took an antidepressant only during the third trimester were 75% less likely to be breastfeeding at discharge. Those who took an antidepressant only during the first and second trimesters did not have a reduced likelihood of breastfeeding at discharge.[7] The antidepressants used by the mothers were not specified.

A retrospective cohort study of hospital electronic medical records from 2001 to 2008 compared women who had been dispensed an antidepressant during late gestation (n = 575) to those who had a psychiatric illness but did not receive an antidepressant (n = 1552) and mothers who did not have a psychiatric diagnosis (n = 30,535). Women who received an antidepressant were 37% less likely to be breastfeeding at discharge than women without a psychiatric diagnosis, but no less likely to be breastfeeding than untreated mothers with a psychiatric diagnosis.[8] None of the mothers were taking desipramine.

In a study of 80,882 Norwegian mother-infant pairs from 1999 to 2008, new postpartum antidepressant use was reported by 392 women and 201 reported that they continued antidepressants from pregnancy. Compared with the unexposed comparison group, late pregnancy antidepressant use was associated with a 7% reduced likelihood of breastfeeding initiation, but with no effect on breastfeeding duration or exclusivity. Compared with the unexposed comparison group, new or restarted antidepressant use was associated with a 63% reduced likelihood of predominant, and a 51% reduced likelihood of any breastfeeding at 6 months, as well as a 2.6-fold increased risk of abrupt breastfeeding discontinuation. Specific antidepressants were not mentioned.[9]

### Alternate Drugs to Consider

Nortriptyline, Paroxetine, Sertraline

### References

1 Uguz F. (2021). A new safety scoring system for the use of psychotropic drugs during lactation. Am J Ther.
2 Weissman AM, Levy BT, Hartz AJ, et al. (2004). Pooled analysis of antidepressant levels in lactating mothers, breast milk, and nursing infants. Am J Psychiatry.
3 Stancer HC, Reed KL. (1986). Desipramine and 2-hydroxydesipramine in human breast milk and the nursing infant's serum. Am J Psychiatry.
4 Birnbaum CS, Cohen LS, Bailey JW, et al. (1999). Serum concentrations of antidepressants and benzodiazepines in nursing infants: A case series. Pediatrics.
5 Misri S, Sivertz K. (1991). Tricyclic drugs in pregnancy and lactation: A preliminary report. Int J Psychiatry Med.
6 Madhusoodanan S, Parida S, Jimenez C. (2010). Hyperprolactinemia associated with psychotropics--a review. Hum Psychopharmacol.
7 Venkatesh KK, Castro VM, Perlis RH, et al. (2017). Impact of antidepressant treatment during pregnancy on obstetric outcomes among women previously treated for depression: An observational cohort study. J Perinatol.
8 Leggett C, Costi L, Morrison JL, et al. (2017). Antidepressant use in late gestation and breastfeeding rates at discharge from hospital. J Hum Lact.
9 Grzeskowiak LE, Saha MR, Nordeng H, et al. (2022). Perinatal antidepressant use and breastfeeding outcomes: Findings from the Norwegian Mother, Father and Child Cohort Study. Acta Obstet Gynecol Scand.

## Substance Identification

### Substance Name

Desipramine

### CAS Registry Number

50-47-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antidepressive Agents

Antidepressive Agents, Tricyclic